# Gepotidacin

CASRN: 1075236-89-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of gepotidacin during breastfeeding. If a mother requires gepotidacin, it is not a reason to discontinue breastfeeding. Monitor the infant for diarrhea, vomiting, colic and adequate weight gain.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ciprofloxacin, Levofloxacin, Trimethoprim

## Substance Identification

### Substance Name

Gepotidacin

### CAS Registry Number

1075236-89-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents, Urinary

Antibacterial Agents